# Tick-Borne Encephalitis Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tick-borne encephalitis vaccine during breastfeeding. In general, vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants.[1,2] Because the vaccine is inactivated and contains no live virus, it cannot infect the mother or infant. No non-live vaccine has previously been reported to cause infant adverse effects via breastfeeding.[3] Maternal vaccination with tick-borne encephalitis vaccine is not a contraindication to breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gruslin A, Steben M, Halperin S, et al. Immunization in pregnancy: No. 220, December 2008. Int J Gynaecol Obstet 2009;105:187–91.19367691
2 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
3 Anderson PO. Maternal vaccination and breastfeeding. Breastfeed Med 2019;14:215–7.30888205

## Substance Identification

### Substance Name

Tick-Borne Encephalitis Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines